# Praziquantel

CASRN: 55268-74-1

## Drug Levels and Effects

### Summary of Use during Lactation

Because of the minute levels of praziquantel in breastmilk, amounts ingested by the infant are small and would not be expected to cause any adverse effects in breastfed infants. Expert opinion holds that lactation should not be a contraindication to maternal treatment with praziquantel.[1-3]

### Drug Levels

Maternal Levels. Five women were given a single oral dose of praziquantel of about 50 mg/kg. The average peak milk level of 440 mcg/L usually occurred 2 hours after the dose, although the peak occurred 6 hours after the dose in 1 individual. By 24 hours after the dose, the drug was undetectable (<4 mcg/L) in 4 women and near the lower limit of detection (6 mcg/L) in the other. The authors calculated that the average amount excreted into milk in 24 hours was 27 mcg (range 6.8 to 75 mcg) which corresponded to 0.0087% of the total (not weight-adjusted) dosage.[4]

The same paper reported another 5 women given three 20 mg/kg oral doses at 4-hour intervals. With this regimen, peaks were observed 4 and 10 hours after the first dose. A meal near the second dose probably delayed its absorption. The peaks were 250 and 460 mcg/L, respectively. The authors calculated that the average amount excreted into milk in 24 hours was 25.6 mcg (range 4.6 to 49 mcg) which corresponded to 0.0007% of the total (not weight-adjusted) dosage.[4]

Fifteen women in the Philippines who were 5 to 7 months postpartum and infected with Schistosoma japonicum were given praziquantel 30 mg/kg twice at an interval of 3 hours. The average milk praziquantel level was 0.185 mg/L. Praziquantel elimination from milk had a half-life averaging 1.9 hours and paralleled plasma elimination. By 24 hours after the dose, the milk level was estimated to be 4 mcg/L. Using the average milk level, the authors estimated that a fully breasted infant would receive about 0.028 mg/kg daily, which would be about 0.05% of the maternal weight-adjusted dosage.[5]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Olds GR. Administration of praziquantel to pregnant and lactating women. Acta Tropica 2003;86:185-95.12745136
2 Friedman JF, Olveda RM, Mirochnick MH, . Praziquantel for the treatment of schistosomiasis during human pregnancy. Bull World Health Organ 2018;96:59-65.29403101
3 Honkpehedji YJ, Gerstenberg J, Adegbite BR, . Schistosomiasis in pregnancy and lactation. Lancet Glob Health 2026;14:103932.42127961
4 Pütter J, Held F. Quantitative studies on the occurrence of praziquantel in milk and plasma of lactating women. Eur J Drug Metab Pharmacokinet 1979;4:193-8.575330
5 Bustinduy AL, Kolamunnage-Dona R, Mirochnick MH, . Population pharmacokinetics of praziquantel in pregnant and lactating Filipino women infected with Schistosoma japonicum. Antimicrob Agents Chemother 2020;64:e00566-20.32631820

## Substance Identification

### Substance Name

Praziquantel

### CAS Registry Number

55268-74-1

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Infective Agents

Anthelmintics

Antiparasitic Agents